# Phentermine

CASRN: 122-09-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of phentermine during breastfeeding. Phentermine and its combination with topiramate are not recommended during breastfeeding. Alternate drugs are preferred to phentermine.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Orlistat, Semaglutide, Tirzepatide

## Substance Identification

### Substance Name

Phentermine

### CAS Registry Number

122-09-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Obesity Agents